# I 123-Labeled Human Serum Albumin

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of 123-labeled human serum albumin (I 123 HSA) as a diagnostic agent. The International Commission on Radiological Protection states that breastfeeding should be interrupted for more than 3 weeks following diagnostic use of I 123 HSA. This usually will result in permanent discontinuation of breastfeeding for this infant.[1] However, this assumes that I 123 is contaminated with other iodine isotopes, which does not occur any longer and a discontinuation period as short as 3 days may be acceptable.[2] Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level, she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[3]

### Drug Levels

I 123 is a gamma emitter with a principal photon energy of 159 keV and a physical half-life of 13.1 hours.[2] Iodide is actively secreted into breastmilk and actively taken up by the mother's and infant's thyroid glands.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mattsson S, Johansson L, Leide Svegborn S, et al. Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44 (2 Suppl):319-21.
2 Dilsizian V, Metter D, Palestro C, Zanzonico P. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf
3 Stabin MG, Breitz HB. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203

## Substance Identification

### Substance Name

I 123-Labeled Human Serum Albumin

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Iodine Radioisotopes

Serum Albumin, Radio-Iodinated

Diagnostic Agents